# Tirbanibulin

CASRN: 897016-82-9

## Drug Levels and Effects

### Summary of Use during Lactation

Topical tirbanibulin has not been studied during breastfeeding. However, after topical administration, serum concentrations are very low and the drug is 88% bound to plasma proteins, so amounts in milk are likely to be very low. If tirbanibulin is required by the mother, it is not a reason to discontinue breastfeeding. Do not apply tirbanibulin to the breast or nipple and ensure that the infant's skin does not come into direct contact with the areas of skin that have been treated.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Tirbanibulin

### CAS Registry Number

897016-82-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Dermatologic Agents